# Oritavancin

CASRN: 171099-57-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of oritavancin during breastfeeding. Oritavancin is poorly absorbed orally, so it is not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants. Monitor the infant for possible effects on the gastrointestinal tract, such as diarrhea, vomiting, and candidiasis (e.g., thrush, diaper rash). However, because there is no published experience with oritavancin during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Clindamycin, Daptomycin, Doxycycline, Trimethoprim-Sulfamethoxazole, Vancomycin

## Substance Identification

### Substance Name

Oritavancin

### CAS Registry Number

171099-57-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Anti-Bacterial Agents

Glycopeptides

Lipoglycopeptides